# Rifamycin

CASRN: 6998-60-3

## Drug Levels and Effects

### Summary of Use during Lactation

Rifamycin is negligibly absorbed orally and used only for gastrointestinal infections. It is not likely to reach the breastmilk or bloodstream of the infant or cause any adverse effects in breastfed infants after maternal use. If a mother requires rifamycin, it is not a reason to discontinue breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Rifamycin

### CAS Registry Number

6998-60-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Gastrointestinal Agents

Rifamycins